# Icaridin

CASRN: 119515-38-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of icaridin (picaridin) during breastfeeding. However, the Centers for Disease Control and Prevention and U.S. Environmental Protection Agency consider icaridin to be safe and effective during breastfeeding when used as directed. It should be used by breastfeeding women to avoid exposure to mosquito-borne viruses.[1] Avoid application directly to the nipple and other areas where the infant might directly ingest the product.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Citriodiol, Diethyltoluamide, Insect Repellent M 3535

### References

1 Centers for Disease Control and Prevention. Avoid bug bites. Accessed 5/20/2021. http://wwwnc.cdc.gov/travel/page/avoid-bug-bites#repellent

## Substance Identification

### Substance Name

Icaridin

### CAS Registry Number

119515-38-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Insect Repellents